# Povidone-Iodine

CASRN: 25655-41-8

## Drug Levels and Effects

### Summary of Use during Lactation

The use of povidone-iodine in the mother near term and during breastfeeding increases breastmilk iodine levels and can cause transient hypothyroidism in breastfed infants, especially in geographic areas that are iodine deficient. Maternal exposure to povidone-iodine near term can sometimes interfere with thyroid studies done as a part of newborn screening tests. Although iodine from povidone-iodine is minimally absorbed through intact adult skin, exposure of mothers who are or will be breastfeeding to povidone-iodine should be minimized by using lower concentrations of povidone-iodine, applying it to the smallest possible surface areas of the body, shortening contact time, and avoiding repeated applications. If povidone iodine is removed from the abdomen with alcohol within several minutes after its application for cesarean section delivery, it is absorbed into the bloodstream and excreted in breastmilk, but may not affect neonatal urinary iodine, TSH or FT4 during the perinatal period.[1] Iodine absorption can be extensive with vaginal use; avoid douching with povidone iodine or use of iodine-containing tampons during breastfeeding. Iodine has not been measured in milk after the use of povidone-iodine nasal spray.

### Drug Levels

Maternal Levels. Random samples of breastmilk from day 5 postpartum in 140 women were analyzed for iodine content. Iodine levels in milk samples were 0.095 mg/L in mothers not exposed to any iodine (n = 91). In women who had 10% povidone iodine (10 mg/mL of iodine) topically applied, iodine levels were about 0.14 mg/L in women who had it applied once to 900 square cm of skin for epidural analgesia (n = 39), and about 1.2 mg/L in women who it applied to the entire abdominal wall 3 times before cesarean section (n = 10).[2]

Iodine milk levels were measured in a study of mothers who received 10% povidone-iodine (n = 21) or chlorhexidine (n = 13) topically to the perineum starting immediately before the final stage of labor and daily postpartum to the episiotomy. At 96 hours postpartum, milk iodine levels averaged 1.2 mg/L in mothers who received topical povidone-iodine compared to average milk levels of 0.1 mg/L in the mothers who received chlorhexidine.[3]

A study randomized 80 consecutive term patients into 4 groups who received either povidone-iodine or benzalkonium chloride as a skin disinfectant before delivery and one of these for postpartum vaginal lacerations. Prepartum doses were about 7 mL and postpartum doses were about 0.5 mL. The calculated amount of iodine ingested by the infants in breastmilk during the first 5 days of life correlated well with the amount of povidone-iodine applied to their mothers' skin. Patients who received prepartum povidone-iodine had higher median breastmilk iodide levels on day 5 postpartum than those not exposed (0.93 mg/L pre- and postpartum, 0.76 mg/L prepartum only); those with only postpartum povidone-iodine did not have elevated iodine milk levels (0.62 to 0.64 mg/L).[4]

A nursing mother who was 7.5 months postpartum used povidone-iodine gel containing 50 mg of iodine per 5 gram dose vaginally once daily for 6 days. Three days after discontinuing the gel, total milk iodine levels were 0.55 mg/L which was 3 to 4 times the typical milk iodine levels and over 6 times her serum iodine level. Total iodine levels fell to 0.1 mg/L by day 7 and inexplicably increased to 0.23 mg/L on day 8 after stopping.[5]

A woman began vaginal douching twice daily with povidone-iodine after delivery. On day 22 postpartum, her breastmilk iodine levels were extremely elevated at 5 micromoles/L. After discontinuing douching, her breastmilk iodine levels dropped to normal levels of less than 1 micromole/L by 7 days after discontinuing povidone-iodine douching.[6]

Infant Levels. In a study in Belgium, breastfed infants had urinary iodine levels measured at 5 days of age. Infants whose mothers were not exposed to any iodine (n = 23) had urinary iodine levels of 0.144 mg/L, those whose mothers had 10% povidone-iodine applied to 900 square cm before epidural analgesia (n = 27) had urinary iodine levels of about 0.28 mg/L, and those whose mothers had 10% povidone iodine applied 3 times to their entire abdomen (n = 11) had urinary iodine levels of 1.84 mg/L.[2]

The mother of a 7.5 month-old breastfed (extent not stated) infant used povidone-iodine gel containing 50 mg per 5 gram dose vaginally once daily for 6 days. Two days later, she noted the odor of iodine on her infant. The infant's serum and urinary iodine levels were extremely elevated, with a serum total iodine level of 0.13 mg/L and a urinary level of 1.02 mg/L or 6.8 mg/gram of creatinine. Serum thyroxine and thyrotropin (TSH) were normal.[5]

A woman began using povidone-iodine as a vaginal douche twice daily after delivery. Her breastfed infant developed hypothyroidism accompanied by high urine iodine levels of about 4 micromoles/L. The infant's urine iodine levels were about 0.3 micromoles/L by 2 weeks after the mother discontinued douching.[6]

In a study of mothers who received 10% povidone-iodine (n = 21) or chlorhexidine (n = 13) topically to the perineum starting immediately before the final stage of labor and daily postpartum to the episiotomy, urine iodine levels were measured in their infants. In the infants whose mothers received povidone-iodine, urine iodine levels were much higher at 24 and 48 hours postpartum. At 96 hours postpartum, the breastfed infants (n = 13) infants whose mothers received povidone-iodine had urine iodine levels of 8.3 mg/L compared to levels of 0.4 mg/L in those who did not breastfeed (n = 8) and 0.6 mg/L in the infants of mothers who received chlorhexidine (n = 13).[3]

### Effects in Breastfed Infants

In a study in Belgium, breastfed infants had thyroid function tests measured at 5 days of age. Both basal and thyrotropin-releasing hormone-stimulated thyrotropin (TSH) levels were higher in infants exposed to the breastmilk from mothers who received topical povidone-iodine during delivery. Serum thyroxine (T4) and liothyronine (T3) levels were normal in all groups.[2]

A woman began bathing almost daily with povidone-iodine (1% iodine) and applying povidone-iodine 1% ointment to her skin daily during pregnancy and for 6 weeks postpartum for furunculosis. At 6 weeks of age, her breastfed (extent not stated) infant had a low serum thyroxine level of 4 ng/L (normal 7 to 20 ng/L), a greatly elevated serum thyrotropin level of 99 units/L (normal 0.8 to 5 units/L). The infant was treated with oral levothyroxine until the age of 7 months at which time thyroid function tests and development were normal.[7]

A woman began using povidone-iodine as a vaginal douche twice daily after delivery. Her breastfed infant developed hypothyroidism (low serum thyroxine and high thyrotropin) over the first 3 weeks of life. After oral levothyroxine supplementation of the infant was begun and maternal povidone-iodine was discontinued, the infant's thyroid function tests normalized within a week.[6]

A group of investigators in Belgium reviewed the results of infant thyrotropin levels on day 5 postpartum in 4745 newborn infants delivered over a 2-year period at their hospital. Infants were divided among those whose mothers had iodine overload (n = 3086) from topical povidone-iodine 10% solution during labor and delivery and those whose mothers had no iodine overload (n = 1659). Mothers had povidone-iodine applied either as a single application to 900 square cm for epidural anesthesia or 3 applications to the entire abdominal wall for cesarean section. Breastfed infants whose mothers had iodine overload had a greater risk for having elevated thyrotropin levels and requiring recall for retesting (3.2% with cesarean section and 2.7% with epidural anesthesia) compared to those who did not (0.1%). Bottle-fed infants were affected much less than breastfed infants.[8] After replacing povidone-iodine with chlorhexidine 0.5% in 70% isopropanol for disinfection for 6 months, 1178 infants that were delivered at this institution had no increased rate of elevations in thyroid function tests and a reduced rate of recalls in breastfed infants.[9]

In a study of mothers in Spain who received 10% povidone-iodine (n = 21) or chlorhexidine (n = 13) topically to the perineum starting immediately before the final stage of labor and daily postpartum to the episiotomy, no differences in thyrotropin, thyroxine or free thyroxine was found among their breastfed infants at day 5 to 7 postpartum.[3]

A breastfed infant whose mother was using povidone-iodine as a douche during pregnancy and during the first few weeks after delivery had symptoms of sinus tachycardia and increased concentrations of blood total and free thyroxine at 10 days of age and elevated thyrotropin at 1 month of age. The povidone-iodine was discontinued and the infant's total thyroxine normalized by 1 month of age, free thyroxine normalized by 1.5 months of age and the thyrotropin level normalized by 2.5 months of age. No other explanation for the thyroid function abnormalities could be found except maternal povidone-iodine use, but blood and milk iodine levels were not measured. Povidone-iodine was the probable cause of the adverse reaction in the infant.[10]

A study in Japan randomized 80 consecutive term patients into 4 groups who received either povidone-iodine or benzalkonium chloride as a skin disinfectant before delivery and one of these for postpartum vaginal lacerations. Prepartum doses were about 7 mL and postpartum doses were about 0.5 mL of solution. Infant thyrotropin levels were elevated in the infants whose mothers received topical povidone-iodine pre- and postpartum compared to infants whose mothers received no povidone-iodine. After discontinuing the use of peripartum povidone-iodine, the rate of recall of infants for abnormal thyroid function tests dropped from 4.47% to 0.74%.[4]

In Switzerland, a girl born at 29 weeks of gestation with adequate size for gestational age showed negative TSH screening on day 5. Her mother had developed an abscess of the abdominal wall 1 week after her cesarian section and was treated with povidone-iodine tampons. The baby's TSH was elevated to 23 milliunits/L on day 23, and 288 milliunits/L on day 29. Free thyroxine (T4) levels were decreased to 2.8 ng/L and free liothyronine (T3) with 1.52 ng/L, without signs or symptoms of hypothyroidism. Iodine contents of maternal milk and of infant urine were 4.4 mg/L and 3.9 mg/L, respectively. Treatment with levothyroxine was started, breastfeeding was discontinued and disinfection with povidone-iodine was stopped. The infant's thyroid function tests normalized after 6 days.[11] The infant's abnormal thyroid function tests were probably caused by maternal iodine use.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Chlorhexidine, Benzalkonium Chloride

### References

1 Fuse Y, Ogawa H, Tsukahara Y, et al. Iodine metabolism and thyroid function during the perinatal period: Maternal-neonatal correlation and effects of topical povidone-iodine skin disinfectants. Biol Trace Elem Res 2023;201:2685-700.35931927
2 Chanoine JP, Bourdoux P, Pardou A, et al. Iodinated skin disinfectants in mothers at delivery and impairment of thyroid function in their breastfed infants. In: Medeiros-Neto G, Gaitan E, eds. Frontiers in thyroidology, Vol 2. New York: Plenum Press; 1986:1055-60.
3 Arena Ansotegui J, Emparanza Knorr JI, San Millan Vege MJ, et al. Iodine overload in newborn infants caused by the use of PVP-iodine for perineal preparation of the mother in vaginal delivery. An Esp Pediatr 1989;30:23-6.2648916
4 Koga Y, Sano H, Kikukawa Y, et al. Affect on neonatal thyroid function of povidone-iodine used on mothers during perinatal period. J Obstet Gynaecol (Tokyo 1995) 1995;21:581-5.
5 Postellon DC, Aronow R. Iodine in mother's milk. JAMA 1982;247:463.7054546
6 Delange F, Chanoine JP, Abrassart C, et al. Topical iodine, breastfeeding, and neonatal hypothyroidism. Arch Dis Child 1988;63:106-7.3348642
7 Danziger Y, Pertzelan A, Mimouni M. Transient congenital hypothyroidism after topical iodine in pregnancy and lactation. Arch Dis Child 1987;62:295-6.3566323
8 Chanoine JP, Boulvain M, Bourdoux P, et al. Increased recall rate at screening for congenital hypothyroidism in breast fed infants born to iodine overloaded mothers. Arch Dis Child 1988;63:1207-10.3196047
9 Chanoine JP, Pardou A, Bourdoux P, et al. Withdrawal of iodinated disinfectants at delivery decreases the recall rate at neonatal screening for congenital hypothyroidism. Arch Dis Child 1988;63:1297-8.3196066
10 Rakover Y, Adar H. Thyroid function disturbances in an infant following maternal topical use of Polydine. Harefuah 1989;116:527-9.2792927
11 Casteels K, Punt S, Bramswig J. Transient neonatal hypothyroidism during breastfeeding after post-natal maternal topical iodine treatment. Eur J Pediatr 2000;159:716-7.11014479

## Substance Identification

### Substance Name

Povidone-Iodine

### CAS Registry Number

25655-41-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Local

Antibacterial Agents

Iodophors